# Clotrimazole

CASRN: 23593-75-1

## Drug Levels and Effects

### Summary of Use during Lactation

Because has poor absorption from the skin and vagina and has poor oral bioavailability, it is unlikely to adversely affect the breastfed infant, including after topical application to the nipples. It has been used orally in infants with thrush, sometimes successfully after nystatin has failed.[1] Any excess cream or ointment should be removed from the nipples before nursing. Only water-miscible cream or gel products should be applied to the breast because ointments may expose the infant to high levels of mineral paraffins via licking.[2]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Fluconazole, Miconazole, Nystatin

### References

1 Johnstone HA, Marcinak JF. (1990). Candidiasis in the breastfeeding mother and infant. J Obstet Gynecol Neonatal Nurs.
2 Noti A, Grob K, Biedermann M, et al. (2003). Exposure of babies to C(15)-C(45) mineral paraffins from human milk and breast salves. Regul Toxicol Pharmacol.

## Substance Identification

### Substance Name

Clotrimazole

### CAS Registry Number

23593-75-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antifungal Agents

Dermatologic Agents